# Belumosudil

CASRN: 911417-87-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of belumosudil during breastfeeding. Because belumosudil is >98% bound to plasma proteins, amounts in milk are likely to be low. The manufacturer states that breastfeeding is not recommended during treatment with belinostat, and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Belumosudil

### CAS Registry Number

911417-87-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Protein Kinase Inhibitors